# Pancrelipase

CASRN: 53608-75-6

## Drug Levels and Effects

### Summary of Use during Lactation

Pancrelipase has been used in mothers of breastfed infants with apparent allergy to proteins in breastmilk derived from the maternal diet. This technique seems to have improved symptoms of egg allergy and cow’s milk allergy, such as blood in the stool and colic.[1-3] Pancreatic enzymes are not appreciably absorbed from the mother’s gastrointestinal tract, so they should not reach the infant. Expert opinion considers use of pancrelipase to be acceptable during breastfeeding.[4,5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Des Roches A, Abbott M, Begin P, et al. Oral pancreatic enzyme supplements can reduce excretion of ovalbumin in breast milk. J Investig Allergol Clin Immunol 2014;24:62-3.24765885
2 Repucci A. Resolution of stool blood in breast-fed infants with maternal ingestion of pancreatic enzymes J Pediatr Gastroenterol Nutr 1999;29:500.
3 Schach B, Haight M. Colic and food allergy in the breastfed infant: Is it possible for an exclusively breastfed infant to suffer from food allergy? J Hum Lact 2002;18:50-2.11845737
4 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
5 ABM Clinical Protocol #24: Allergic proctocolitis in the exclusively breastfed infant. Breastfeed Med 2011;6:435-40.22050274

## Substance Identification

### Substance Name

Pancrelipase

### CAS Registry Number

53608-75-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Enzymes